# Lactulose

CASRN: 4618-18-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of lactulose during breastfeeding. Because lactulose is poorly absorbed orally, it is unlikely to reach the breastmilk in large amounts. Any lactulose that the infant absorbs from milk is rapidly eliminated in the urine.[1] Some experts consider lactulose to be a laxative of choice during breastfeeding.[2] Lactulose is unlikely to adversely affect the breastfed infant and no special precautions are required.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mank E, van Harskamp D, van Toledo L, et al. Simultaneous assessment of intestinal permeability and lactase activity in human-milk-fed preterm infants by sugar absorption test: Clinical implementation and analytical method. Clin Nutr 2021;40:1413–9.32948350
2 Gharehbaghi K, Gharehbaghi DR, Wierrani F, et al. Treatment of chronic functional constipation during pregnancy and lactation. Z Geburtshilfe Neonatol 2016;220:9–15.26866689

## Substance Identification

### Substance Name

Lactulose

### CAS Registry Number

4618-18-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Gastrointestinal Agents

Laxatives